# Seaweed

CASRN: 84775-78-0

## Drug Levels and Effects

### Summary of Use during Lactation

Kelp (Fucus vesiculosus, other Fucus species, and Ascophyllum nodosum), also known as bladderwrack, consists of the dried whole plant. It contains soluble fiber (e.g., alginic acid), vitamin B12, iron and iodine. It can also contain heavy metals (e.g., arsenic, cadmium, lead). Brown seaweed (Undaria pinnatifida) is a purported galactogogue in some Asian cultures; however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[1,2] No data exist on the excretion of any organic components of seaweed into breastmilk; however, iodine is actively transported into breastmilk and heavy metals are excreted into milk. For further information on iodine in breastmilk and its potential adverse effects, see the iodine record in LactMed. Some sources recommend against using seaweed during breastfeeding because of its high iodine content,[3-5] and potential contamination with heavy metals.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Iodine is a normal component of human milk. Median values of total iodine (including iodide) in breastmilk in the United States have ranged from 35 to 140 mcg/L.[6]

Maternal Levels. Korean mothers are traditionally given large amounts of brown seaweed soup postpartum, up to 4 or 5 times daily in the first few days postpartum. A study of 50 Korean postpartum mothers measured the amount of iodine in their breastmilk. At 2 to 5 days postpartum, iodine content averaged 2170 mcg/L (range 218 to 8671 mcg/L) or 2.7 mg daily. At 4 weeks postpartum when the seaweed intake was less, iodine averaged 892 mcg/L (range 60 to 3838 mg/L) or 1.3 mg daily.[7]

The breastmilk of the mothers of 31 preterm Korean infants was measured for iodine concentration on week 1, 3 and 6 postpartum. Korean mothers often have elevated iodine levels from large amounts of dietary iodine in brown seaweed soup during the first month postpartum. Median breastmilk iodine levels were 2529, 1153 and 822 mcg/L at the 3 times, respectively.[8]

Infant Levels. The preterm infants of Korean mothers with high levels of breastmilk iodine had relatively high urinary iodine levels that were thought to be related to high maternal intake of iodine from seaweed soup.[8]

### Effects in Breastfed Infants

A study of 31 preterm infants born at 34 weeks gestational age or less was performed in Korea where mothers typically ingest large amounts of seaweed soup during the first month postpartum. Subclinical hypothyroidism was frequently found in the infants that had high intakes of iodine from breastmilk.[8]

Two mothers originally from Asia (Korea and China) reportedly ate large amounts of soup made from seaweed from their home countries in the postpartum period. Their infants had elevated thyrotropin (TSH) levels when tested at 3 to 4 weeks of age and signs of hypothyroidism. Both were treated with thyroid hormones and regained normal thyroid function.[9]

A 21-day-old breastfed (extent not stated) infant presented with unconjugated hyperbilirubinemia. Neonatal TSH screening was normal, but at 21 days it was 87.3 IU/L (normal 0.27 to 4.2 IU/L). Free T4 was 7.3 pmol/L (normal 12 to 22 pmol/L) and the thyroid was slightly enlarged. The infant's parents were of Korean origin and the mother had consumed 3 to 4 bowls of brown seaweed (Undaria pinnatifida) soup daily from the time of birth. The infant's hypothyroidism was probably caused by the high iodine content of the seaweed soup.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
2 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
3 Kopec K. Herbal medications and breastfeeding. J Hum Lact 1999;15:157-61.10578793
4 Consolini AE, Ragone MI. Patterns of self-medication with medicinal plants and related adverse events - a South American survey. Curr Drug Saf 2010;5:333-41.20615178
5 Rhee SS, Braverman LE, Pino S, et al. High iodine content of Korean seaweed soup: a health risk for lactating women and their infants? Thyroid 2011;21:927-8.21745110
6 Dasgupta PK, Kirk AB, Dyke JV, et al. Intake of iodine and perchlorate and excretion in human milk. Environ Sci Technol 2008;42:8115-21.19031911
7 Moon S, Kim J. Iodine content of human milk and dietary iodine intake of Korean lactating mothers. Int J Food Sci Nutr 1999;50:165-71.10627832
8 Chung HR, Shin CH, Yang SW, et al. Subclinical hypothyroidism in Korean preterm infants associated with high levels of iodine in breast milk. J Clin Endocrinol Metab 2009;94:4444-7.19808851
9 Emder PJ, Jack MM. Iodine-induced neonatal hypothyroidism secondary to maternal seaweed consumption: A common practice in some Asian cultures to promote breast milk supply. J Paediatr Child Health 2011;47:750-2.21276114
10 Hulse T. Transient neonatal hypothyroidism resulting from maternal ingestion of a traditional Korean seaweed soup. Horm Res Paediatr 2012;78 (Suppl 1):127-8. doi:10.1159/000343182 22832081

## Substance Identification

### Substance Name

Seaweed

### Scientific Name

Fucus vesiculosus Undaria pinnatifida

### CAS Registry Number

84775-78-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal